# Acemetacin

CASRN: 53164-05-9

## Drug Levels and Effects

### Summary of Use during Lactation

Acemetacin is not marketed in the United States, but is available in other countries. No information is available on the clinical use of acemetacin during breastfeeding; however, acemetacin is a pro-drug of indomethacin, so the information on indomethacin probably applies equally to acemetacin. If a mother requires acemetacin, it is not a reason to discontinue breastfeeding; however, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

## Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

## Substance Identification

### Substance Name

Acemetacin

### CAS Registry Number

53164-05-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents, Nonsteroidal